# Cefadroxil

CASRN: 50370-12-2

## Drug Levels and Effects

### Summary of Use during Lactation

Cefadroxil is no longer marketed in in the US. Limited information indicates that cefadroxil produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefadroxil is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After a single 500 mg oral dose of cefadroxil in 5 women, peak milk levels ranged from 0.6 to 0.9 mg/L. Peak levels occurred from 5 to 6 hours after the dose with an average of 0.65 mg/L at 5 hours and 0.68 mg/L at 6 hours after the dose.[1]

After a single 1 gram oral dose of cefadroxil in 6 women who were 2 days postpartum, peak levels occurred 6 to 7 hours after the dose and averaged 1.83 mg/L (range 1.2 to 2.4 mg/L).[2]

After a single 500 mg oral dose of cefadroxil in 2 or 3 women, peak milk levels of 0.4 mg/L occurred 4 hours after the dose.[3]

In all of the above studies, cefadroxil was undetectable in most women's milk for the first hour after the dose.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Methicillin-sensitive Staph. aureus) Cefazolin, Cephalexin, Dicloxacillin, Floxacillin, Oxacillin, Methicillin, Nafcillin; (Methicillin-resistant Staph. aureus) Doxycycline, Linezolid, Minocycline, Trimethoprim-Sulfamethoxazole, Vancomycin

### References

1 Takase Z, Shirafuji H, Uchida M. Experimental and clinical studies of cefadroxil in the treatment of infections in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1980;28 (Suppl 2):424-31.
2 Kafetzis DA, Siafas CA, Georgakopoulos PA, et al. Passage of cephalosporins and amoxicillin into the breast milk. Acta Paediatr Scand 1981;70:285-8.7246123
3 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732

## Substance Identification

### Substance Name

Cefadroxil

### CAS Registry Number

50370-12-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins